# Ivabradine

CASRN: 155974-00-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of ivabradine during breastfeeding. Because it is 70% plasma protein bound, the amount of ivabradine in milk is likely to be low. However, an alternate drug is preferred, especially when nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Ivabradine

### CAS Registry Number

155974-00-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cardiovascular Agents